# Belatacept

CASRN: 706808-37-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information from one patient indicates that the drug may be used in nursing mothers; however, more data are needed. Since glycosylated belatacept has a molecular weight of 92,300 Da, it is unlikely to appear in milk. The manufacturer recommends avoiding nursing if belatacept is given. Because the drug’s half-life is 8 to 10 days, it may be more than a month after a dose before the drug is absent from breastmilk. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother with a liver transplant was maintained on belatacept 10 mg/kg monthly, slow-release tacrolimus (Envarsus and Veloxis) 2 mg daily, azathioprine 25 mg daily, and prednisone 2.5 mg daily. She breastfed her infant for a year (extent not stated). The infant’s growth and cognitive milestones were normal.[2]

In a case series from the Transplant Pregnancy Registry International of women who received belatacept during pregnancy and postpartum, 5 women with kidney transplants breastfeed their 7 children while continuing belatacept infusions with no reports of problems breastfeeding or issues in the children. The duration and extent of breastfeeding was not reported in 4 instances, but in the other 3, the durations were 1 month, 2 months, and 4 weeks exclusive breastfeeding, followed by partial breastfeeding.[3] A review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that 6 mothers with transplants had breastfed their infants for at least 4 weeks while taking belatacept.[4] These 6 probably included the 5 women reported above.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus

### References

1 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
2 Klintmalm GB, Gunby RT, Jr. Successful pregnancy in a liver transplant recipient on belatacept. Liver Transpl 2020;26:1193–4.32337853
3 Coscia L, Cohen D, Dube GK, . Outcomes with belatacept exposure during pregnancy in kidney transplant recipients: A case series. Transplantation 2023;107:2047–54.37287109
4 Coscia LA, Kliniewski D, Rao S, . Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820

## Substance Identification

### Substance Name

Belatacept

### CAS Registry Number

706808-37-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents